# Physostigmine

CASRN: 57-47-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of physostigmine during breastfeeding. It should be used during breastfeeding if it is essential to the mother’s health.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release,[1] and physostigmine increases serum prolactin in humans.[2,3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Clarke G, Fall C, Lincoln D, et al. Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol 1978;63:519-27.566601
2 Risch S, Janowsky D, Siever L, et al. Cholinomimetic-induced co-release of prolactin and beta-endorphin in man. Psychopharmacol Bull 1982;18:21-5.6296908
3 Risch S, Janowsky D, Siever L, et al. Correlated cholinomimetic-stimulated beta-endorphin and prolactin release in humans. Peptides 1982;3:319-22.6289276

## Substance Identification

### Substance Name

Physostigmine

### CAS Registry Number

57-47-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cholinesterase Inhibitors

Parasympathomimetics